# Black Cohosh

CASRN: 84776-26-1

## Drug Levels and Effects

### Summary of Use during Lactation

Black cohosh (Cimicifuga racemosa, formerly Actaea racemosa) root was thought to have mild estrogenic activity based on its triterpene content, which is standardized based on 27-deoxyactein. However, recent studies have found no estrogenic activity.[1,2] It is primarily used for postmenopausal symptoms and has been used to promote labor.[3-8] Currently, it has no specific uses during breastfeeding, although historically it was supposedly used by native American women as a galactogogue.[9] No data exist on the safety and efficacy of black cohosh in nursing mothers or infants. In general, there is a low frequency of adverse reactions, but dizziness, nausea, headache, rash, vomiting, and rarely, hepatitis and allergic reactions have been reported.[3,10,11] Some sources recommend against its use during breastfeeding because of the lack of safety data and its potential estrogenic activity,[10] while others do not contraindicate its use.[9]

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Liske E, Hanggi W, Henneicke-von Zepelin HH, et al. (2002). Physiological investigation of a unique extract of black cohosh (Cimicifugae racemosae rhizoma): a 6-month clinical study demonstrates no systemic estrogenic effect. J Womens Health Gend Based Med.
2 Ruhlen RL, Haubner J, Tracy JK, et al. (2007). Black cohosh does not exert an estrogenic effect on the breast. Nutr Cancer.
3 Dennehy C, Tsourounis C, Bui L, et al. (2010). The use of herbs by California midwives. J Obstet Gynecol Neonatal Nurs.
4 Zhang AL, Story DF, Lin V, et al. (2008). A population survey on the use of 24 common medicinal herbs in Australia. Pharmacoepidemiol Drug Saf.
5 Dugoua JJ, Seely D, Perri D, et al. (2006). Safety and efficacy of black cohosh (Cimicifuga racemosa) during pregnancy and lactation. Can J Clin Pharmacol.
6 Allaire AD, Moos MK, Wells SR. (2000). Complementary and alternative medicine in pregnancy: A survey of North Carolina certified nurse-midwives. Obstet Gynecol.
7 Tesch BJ. (2003). Herbs commonly used by women: an evidence-based review. Am J Obstet Gynecol.
8 Low Dog T. (2009). The use of botanicals during pregnancy and lactation. Altern Ther Health Med.
9 McKenna DJ, Jones K, Humphrey S, et al. (2001). Black cohosh: efficacy, safety, and use in clinical and preclinical applications. Altern Ther Health Med.
10 Hardy ML. (2000). Women's health series: Herbs of special interest to women. J Am Pharm Assoc (Wash).
11 Mahady GB, Low Dog T, Barrett ML, et al. (2008). United States Pharmacopeia review of the black cohosh case reports of hepatotoxicity. Menopause.

## Substance Identification

### Substance Name

Black Cohosh

### Scientific Name

Cimicifuga racemosa

### CAS Registry Number

84776-26-1

### Drug Class

Breast Feeding

Lactation

Complementary Therapies

Phytotherapy

Plants, Medicinal